# Pentazocine

CASRN: 359-83-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pentazocine during breastfeeding. Maternal use of oral opioids during breastfeeding can cause infant drowsiness, which may progress to rare but severe central nervous system depression. Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. If pentazocine is required by the mother of a newborn, it is not a reason to discontinue breastfeeding; however, once the mother's milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of pentazocine to 2 to 3 days at a low dosage with close infant monitoring. If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately. Combination products with naloxone carry the same considerations. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped. Other agents are preferred over pentazocine during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Pentazocine can increase serum prolactin.[1,2] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine

### References

1 Rolandi E, Barreca T. Effects of two analgesic opiates (methadone and pentazocine) on the serum prolactin levels in breast cancer. Acta Endocrinol (Copenh) 1978;88:452–4.581016
2 Manner T, Kanto J, Scheinin H, et al. Meptazinol and pentazocine: Effects on prolactin, growth hormone and vasopressin levels in plasma. Pharmacol Toxicol 1987;61:301–4.3438224

## Substance Identification

### Substance Name

Pentazocine

### CAS Registry Number

359-83-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Narcotic Antagonists

Opiates